# Esketamine

CASRN: 33643-46-8

## Drug Levels and Effects

### Summary of Use during Lactation

Esketamine is the more potent S-isomer of the racemic drug, ketamine. Single doses or infusions of intravenous esketamine during or after cesarean section delivery may not affect the breastfed infant and may improve the onset and frequency of lactation in the early postpartum period. Esketamine nasal spray used as an antidepressant has not been studied during breastfeeding. Until more data are available, repeated doses esketamine nasal spray should probably be avoided during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four mothers who received epidural analgesia with lidocaine and bupivacaine for cesarean section also received general anesthesia with ketamine and midazolam (dosages not specified). Their infants were either breastfed or received their mother’s breastmilk by bottle. No adverse effects were reported in the infants.[1]

### Effects on Lactation and Breastmilk

A pregnant woman sustained 28% body surface area burns near term. She underwent an emergency cesarean section on her due date under ketamine anesthesia. Although the infant required vigorous resuscitation, the infant began breastfeeding immediately. The infant had transient jaundice that resolved in a few days.[2]

A study compared women undergoing cesarean section who received either placebo or S-ketamine (esketamine) 0.5 mg/kg intramuscularly, followed by a continuous infusion of 2 mcg/kg/minute for 12 hours. This low dose was used to enhance analgesia and reduce residual pain rather than to provide anesthesia. All women received intraspinal bupivacaine 8 to10 mg and sufentanil 5 mcg for analgesia, as well as midazolam 0.02 mg/kg intravenously before the S-ketamine or placebo injection. Postoperatively, patients received patient-controlled intravenous morphine for 24 hours, followed by acetaminophen, oral ketorolac and a single dose of ondansetron 8 mg intravenously as needed. Of the 56 patients enrolled in the study (28 in each group), 13 in each group were contacted at 3 years postpartum. Patients who received placebo reported breastfeeding for an average of 10.5 months and those who received S-ketamine reported breastfeeding for an average of 8 months; however, the difference was not statistically significant.[3]

A randomized, double-blind study compared the effects of intravenous propofol 0.25 mg/kg, ketamine 0.25 mg/kg, ketamine 25 mg plus propofol 25 mg, and saline placebo for pain control in mothers post-cesarean section. A single dose was given immediately after clamping of the umbilical cord. The time to the first breastfeeding was 58 minutes in those who received placebo, 31.9 minutes with ketamine and 25.8 minutes with propofol plus ketamine. The time was significantly shorter than the other groups with the combination.[4]

A study of women with gestational diabetes undergoing elective cesarean section randomized them to postoperative patient-controlled analgesia with either intravenous esketamine 0.5 mg/kg, sufentanil 150 mcg and ondansetron 4 mg (n = 70) or sufentanil and ondansetron alone in the same doses (n = 70). There was no difference between the groups in the time to first lactation, with most beginning at 24 to 48 hours after delivery.[5]

A prospective study compared two groups of women undergoing cesarean section. The study group (n = 68) received esketamine 0.2 mg/kg intravenously over 40 minutes, while the control group (n = 68) received normal saline. Both groups received PCIA with butorphanol, flurbiprofen and dexamethasone and other routine postoperative care. The study group had earlier first breastfeeding and more breastfeeding sessions within 48 hours after surgery. The mothers who received esketamine had lower scores on the Edinburgh Postnatal Depression Scale than the control mothers on days 2 and 7 postpartum.[6]

### References

1 Ortega D, Viviand X, Lorec AM, . Excretion of lidocaine and bupivacaine in breast milk following epidural anesthesia for cesarean delivery. Acta Anaesthesiol Scand 1999;43:394-7.10225071
2 Mokube JA, Verla VS, Mbome VN, . Burns in pregnancy: A case report from Buea Regional Hospital, Cameroon. Pan Afr Med J 2009;3:21.21532730
3 Suppa E, Valente A, Catarci S, . A study of low-dose S-ketamine infusion as “preventive” pain treatment for cesarean section with spinal anesthesia: Benefits and side effects. Minerva Anestesiol 2012;78:774-81.22374377
4 Jaafarpour M, Vasigh A, Khajavikhan J, . Effect of ketofol on pain and complication after Caesarean delivery under spinal anaesthesia: A randomized double-blind clinical trial. J Clin Diagn Res 2017;11:UC04-UC7.
5 Han T, Chen Q, Huang J, . Low-dose esketamine with sufentanil for postcesarean analgesia in women with gestational diabetes mellitus: A prospective, randomized, double-blind study. Front Endocrinol (Lausanne) 2023;14:1202734.37635978
6 Jing R, Tu Y. Single low-dose esketamine improves postpartum depression symptoms and recovery quality in cesarean section women. Am J Transl Res 2026;18:1287-97.41868913

## Substance Identification

### Substance Name

Esketamine

### CAS Registry Number

33643-46-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressants